# Teclistamab

CASRN: 2119595-80-9

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of teclistamab during breastfeeding. Because teclistamab is a large protein molecule with a molecular weight of 146,000 Da, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2] The manufacturer recommends that breastfeeding be withheld during therapy and for 5 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Teclistamab

### CAS Registry Number

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic agents

Monoclonal antibodies